# Zanubrutinib

CASRN: 1691249-45-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of zanubrutinib during breastfeeding. Because zanubrutinib is 94% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during zanubrutinib therapy and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Zanubrutinib

### CAS Registry Number

1691249-45-2

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Enzyme Inhibitors

Hematologic Agents

Protein Kinase Inhibitors